# Treosulfan

CASRN: 299-75-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of treosulfan during breastfeeding. Most sources consider breastfeeding to be contraindicated during maternal cytotoxic antineoplastic drug therapy, especially alkylating agents such as treosulfan. The manufacturer recommends to not breastfeed during treatment and for 1 week after the last dose. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[1] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513

## Substance Identification

### Substance Name

Treosulfan

### CAS Registry Number

299-75-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Alkylating Agents